# Terconazole

CASRN: 67915-31-5

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Vaginal terconazole has not been studied during breastfeeding. Other antifungal agents may be preferred, especially while nursing a newborn or preterm infant

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Clotrimazole, Miconazole

## Substance Identification

### Substance Name

Terconazole

### CAS Registry Number

67915-31-5

### Drug Class

- Breast Feeding
- Lactation
- Anti-Infective Agents
- Antifungal Agents